# Minocycline

CASRN: 10118-90-8

## Drug Levels and Effects

### Summary of Use during Lactation

Many reviews state that tetracyclines are contraindicated during breastfeeding because of possible staining of infants’ dental enamel or bone deposition of tetracyclines. However, available literature indicates that there is not likely to be harm in short-term use of minocycline during lactation because milk levels are low and absorption by the infant is inhibited by the calcium in breastmilk. Although the manufacturer recommends avoiding breastfeeding during administration of minocycline and for 4 days after the last dose, short-term use of minocycline is probably acceptable in nursing mothers. As a theoretical precaution, avoid prolonged or repeat courses during nursing. Monitor the infant for rash and for possible effects on the gastrointestinal flora, such as diarrhea or candidiasis (thrush, diaper rash). Black discoloration of breastmilk has been reported with minocycline. Topical minocycline for acne by the mother poses no risk to the breastfed infant.

### Drug Levels

Maternal Levels. After a single dose of minocycline 200 mg orally in 2 patients (time postpartum not stated), a peak milk level of 0.8 mg/L occurred at 6 hours after the dose. Average milk levels ranged between 0.5 and 0.8 mg/L during the 12 hours after the dose and a total of 18 mcg was excreted during this time.[1]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

A woman taking minocycline 100 mg twice daily for almost 4 years developed galactorrhea after taking perphenazine, amitriptyline and diphenhydramine, and the breast secretion was black in color.[2]

Another woman who had nursed her infant and produced occasional small amounts of breastmilk during the 18 months after weaning was given oral minocycline 150 mg daily. After 3 to 4 weeks, expressed milk had become black. Iron levels in milk were over 100 times greater than that found in normal milk. A mammogram was normal.[3]

In both of these cases, macrophages containing a black, iron-containing pigment were found in milk. It is thought that the pigment is an iron chelate of minocycline or one of its metabolites.[2,3]

### Alternate Drugs to Consider

Doxycycline, Tetracycline

### References

1 Mizuno S, Taketa M, Sano S, . Minocycline. Jpn J Antibiot 1969;22:473–9.4909972
2 Basler RS, Lynch PJ. Black galactorrhea as a consequence of minocycline and phenothiazine therapy. Arch Dermatol 1985;121:417–8.4038862
3 Hunt MJ, Salisbury EL, Grace J, . Black breast milk due to minocycline therapy. Br J Dermatol 1996;134:943–44.8736342

## Substance Identification

### Substance Name

Minocycline

### CAS Registry Number

10118-90-8

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-Infective Agents

Antibacterial Agents

Tetracyclines